# Cefoperazone

CASRN: 62893-19-0

## Drug Levels and Effects

### Summary of Use during Lactation

Cefoperazone is no longer marketed in the United States. Limited information indicates cefoperazone produces low levels in milk that are not expected to cause adverse effects in breastfed infants. Occasionally disruption of the infant's gastrointestinal flora, resulting in diarrhea or thrush have been reported with cephalosporins, but these effects have not been adequately evaluated. Cefoperazone is acceptable in nursing mothers.

### Drug Levels

Maternal Levels. After 1 gram of cefoperazone intravenously in 5 women, it was undetectable in milk in 2 women at any time up to 6 hours after the dose. The average peak milk levels of 0.33 mg/L occurred 2 hours after the dose, but in individuals, peak levels occurred 2, 3 or 4 hours after the dose.[1]

After 1 gram of cefoperazone given intravenously in 2 women, milk cefoperazone was 0.1 mg/L at 2 hours and 0.3 mg/L 3 hours after the dose. It was undetectable in milk 1 and 6 hours after the dose.[2,3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Takase Z, Shirafuji H, Uchida M. Fundamental and clinical studies of cefoperazone (T-1551) in the field of obstetrics and gynecology. Chemotherapy (Tokyo) 1980;28 (Suppl 6):825-36.
2 Matsuda S. Transfer of antibiotics into maternal milk. Biol Res Pregnancy Perinatol 1984;5:57-60.6743732
3 Matsuda S, Kashiwagura T, Hirayama H. Passage into the human milk and clinical evaluation of sulbactam/cefoperazone. Jpn J Antibiot 1985;38:223-9.2989572

## Substance Identification

### Substance Name

Cefoperazone

### CAS Registry Number

62893-19-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antibacterial Agents

Cephalosporins